# Calaspargase Pegol

CASRN: 130167-69-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of calaspargase pegol during breastfeeding. Because calaspargase is a large protein molecule with a molecular weight of about 140,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Polyethylene glycol is not excreted into breastmilk.[3] However, the manufacturer recommends that the drug not be used during breastfeeding and for 3 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Clowse ME, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890-6.28814432

## Substance Identification

### Substance Name

Calaspargase Pegol

### CAS Registry Number

130167-69-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzymes